# Amanita Mushroom Poisoning

CASRN: 23109-05-9

## Drug Levels and Effects

### Summary of Use during Lactation

Amatoxins are water soluble, heat stable polypeptides found in Amanita (most often Amanita phalloides), Galerina and some Lepiota species. The main toxin from the species A. phalloides is alpha-amanitin, a cyclic octapeptide. It is a potent inhibitor of RNA polymerases that blocks the production of mRNA and protein synthesis in liver and kidney cells.[1] In two cases, an infant developed elevated liver enzymes after nursing after maternal ingestion of Amanita sp. However, two well-documented cases found no adverse effects in breastfed infants and no amatoxin in the milk. Nevertheless, mothers suspected of having Amanita mushroom poisoning probably should not breastfeed until they have recovered or toxicologic screening of the breastmilk has ruled out toxicity.

### Drug Levels

Maternal Levels. A 32-year-old mother shared a meal of foraged mushrooms (Amanita bisporigera), and developed symptoms 15 hours post-ingestion. Amatoxin was undetectable in the milk, although the timing of the milk sample was not stated.[2]

A 33-year-old woman picked about 200 mushrooms in the forest in France. She cooked and ate some of them, then breastfed her 5-month-old daughter 3 times a day over the next 36 hours. The mushrooms were identified as mainly Amanita phalloides along with Paxillus involutus, Amanita rubescens, and Chlorophyllum rhacodes. The mother’s urine collected in the emergency department was positive for amatoxin. A breastmilk sample collected 41 hours postingestion had no detectable amatoxin by LC-MS/MS.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In Germany, a 20-year-old nursing mother ate a meal of solely mushrooms identified in the report as green tuberous mushroom (Amanita phalloides). The next morning around 11.5 hours after mushroom ingestion, she nursed her 10-week-old infant who weighed 5 kg. The meal consisted of 80 to 100 mL of breastmilk and the same amount of ready-to-use infant formula (Milasan-Neu). At this time the mother already had symptoms of intoxication (vomiting and diarrhea). Because of the deterioration in her condition, she was unable to continue breastfeeding the child, so the child received only formula thereafter. After the mother was admitted to the hospital for Amanita phalloides poisoning and had ASAT and ALAT values of 10,000 and 40,000, respectively (normal values about 500-550). The infant was placed under inpatient observation at children’s hospital. The infant’s relatives noticed nothing unusual about the child and the clinical admission examination revealed no visible evidence of a hepatic, cerebral or hematological disease. Six days after maternal mushroom ingestion, the infant’s laboratory values (electrolytes, serum electrophoresis, bilirubin, gamma-GT, alkaline phosphatase, creatinine, blood sugar, urine status, PTT, and PT [Quick test]) were normal except for ASAT and ALAT, which were about double the normal value. These values slowly decreased and became normal at about day 40 after ingestion.[4]

A 32-year-old mother shared a meal of foraged mushrooms (Amanita bisporigera), and developed symptoms 15 hours post-ingestion. She presented to the emergency department 29 hours post-ingestion and was found to have markedly elevated liver enzymes. Her 4 month-old-daughter had breastfed 4 hours post-ingestion. The asymptomatic infant was evaluated 48 hours after breastfeeding and discharged from the emergency department with no evidence of hepatotoxicity.[2]

A 33-year-old woman picked about 200 mushrooms in a forest in France. She cooked and ate some of them, and developed nausea, vomiting and diarrhea 11 hours post-ingestion. She was admitted to the hospital for treatment and had elevated liver enzymes. She had breastfed her 5-month-old daughter 3 times a day over the 36 hours after mushroom ingestion. Her daughter was hospitalized, but did not present any symptoms, nor any biological disturbance.[3]

A family of 8 Syrian immigrants to the US, including one breastfed 9-month-old infant, ingested cooked foraged mushrooms. They presented to the emergency department approximately 8 hours afterwards with gastrointestinal distress. Some required treatment for mushroom poisoning, but all patients made a full recovery and were discharged home. It is not clear from the abstract if the breastfed infant was only breastfed or ingested some mushrooms directly, or if the infant required treatment.[5]

A report from China discusses a 2-year-and-8-month-old previously healthy, female toddler who developed mild elevations in hepatic enzymes and strongly positive occult blood in her stool 20 hours after being intermittently breastfed. Her mother had eaten wild mushrooms that were identified as Amanita subjunquillea (East Asian deathcap). No testing of milk or maternal serum was made for Amanita toxins and the report states that the infant ate no mushrooms. The infant’s mother developed vomiting, diarrhea, severe elevations in hepatic enzymes, and coagulopathy. Six others who were exposed developed similar symptoms. The infant was treated with gastric lavage, 1 gram/kg of activated charcoal orally, 10 mg/kg of reduced glutathione intravenously, and intravenous fluid therapy. The child's liver enzymes normalized within 48 hours, stool occult blood became negative within 3 days, and complete recovery was achieved at discharge.[6] The adverse effects in the infant were possibly caused by mushroom toxin(s) in breastmilk.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Hydzik P, Bielanski W, Ponka M, et al. Usefulness of 13C-methacetin breath test in liver function testing in Amanita phalloides poisoning; breast feeding woman case. Clin Toxicol (Phila) 2008;46:1077–82.18821093
2 Shively RM, Nogar JN, Rella JG, et al. Got milk? A case series of an amatoxin-exposed family, including a breastfeeding mother and infant. Clin Toxicol (Phila) 2020;58:148–9.31070058
3 Galland J, Bourdic F, Yaouanc B, et al. Comment on Got milk? A case series of an amatoxin-exposed family, including a breastfeeding mother and infant. Clin Toxicol (Phila) 2021;59:770.33475424
4 Hallebach M, Kurze G, Springer S, et al. Knollenblätterpilzvergiftung über muttermilch. Z Klin Med 1985;40:943–5.
5 Bassett R, Cabrera K, Gustafson M, et al. Picking your poison: A case series of foraged mushroom toxicity in a refugee family. Clin Toxicol 2024;62 (Suppl. 2):152. doi:10.1080/15563650.2024.2370671
6 Miao X, Zheng S, Sun Y, et al. Breast milk-associated mushroom poisoning in a toddler: A case report. BMC Pediatr 2026;26:474.41963859

## Substance Identification

### Substance Name

Amanita Mushroom Poisoning

### Scientific Name

Amanita phalloides

### CAS Registry Number

11030-71-0 23109-05-9 58250-15-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Foodborne Diseases

Poisoning